# Liotrix

CASRN: 8065-29-0

## Drug Levels and Effects

### Summary of Use during Lactation

Liotrix is a mixture of levothyroxine (T4) and liothyronine (T3), which are normal components of human milk. Limited data on exogenous replacement doses of levothyroxine during breastfeeding indicate no adverse effects in infants. No information is available on the use of exogenous liothyronine during breastfeeding. The American Thyroid Association recommends that subclinical and overt hypothyroidism should be treated with levothyroxine in lactating women seeking to breastfeed.[1] Thyroid dosage requirement may be increased in the postpartum period compared to prepregnancy requirements patients with Hashimoto's thyroiditis.[2]

### Drug Levels

Milk levels of thyroid hormones have not been measured after exogenous administration of liotrix in humans. In a study of a new analytic technique, concentrations of several thyroid hormones were measured in 30 milk samples. The mean levothyroxine (T4) concentration was 94 mcg/L (range 48 to 194 mcg/L) and the mean dextrothyroxine concentration was 135 mcg/L (range 115 to 158 mcg/L). The mean liothyronine (T3) concentration was 52 mcg/L (range 32 to 109 mcg/L) and the mean reverse T3 concentration was 65 mcg/L (range 21 to 180 mcg/L). Among the 30 samples, the dextrothyroxine concentration was always higher than the levothyroxine concentration, and the reverse T3 concentration was always higher than the liothyronine concentration. The levels of levothyroxine were also higher than liothyronine levels. Several other thyroid hormones such as thyroxine; monoiodothyronine; 3,3 and 3,5-diiodothyronine were also measured.[3]

Although somewhat controversial, it appears that levothyroxine passes into milk poorly and that liothyronine might pass into milk in amounts that affect infant thyroid status.[4-8]

Maternal Levels. In a study of 56 mothers with thyroid disorders, 50 had hypothyroidism and were being treated with levothyroxine; 5 mothers had controlled hyperthyroidism with no medications and 1 had hyperthyroidism treated with a medication. Milk levels of thyroid hormones were free T4 4.5 ng/L, total T4 29.6 mcg/L, free T3 2.3 ng/L and total T3 0.35 mcg/L. The average milk to serum level ratios over the period were free T4 0.32 and total T4 0.3. Levels of free and total T3 and total T4 in milk were positively correlated with their respective plasma levels.[9]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Effects of exogenous thyroid hormone administration to mothers on their infant have not been reported. One case of apparent mitigation of cretinism in hypothyroid infants by breastfeeding has been reported, but the amounts of thyroid hormones in milk are not optimal,[10] and this result has been disputed.[11] The thyroid hormone content of human milk from the mothers of very preterm infants appears not to be sufficient to affect the infants' thyroid status.[12] The amounts of thyroid hormones in milk are apparently not sufficient to interfere with diagnosis of hypothyroidism.[13]

In a telephone follow-up study, 5 nursing mothers reported taking levothyroxine (dosage unspecified). The mothers reported no adverse reactions in their infants.[14]

One mother who had undergone a thyroidectomy was taking levothyroxine 100 mcg daily as well as calcium carbonate and calcitriol. Her breastfed infant was reportedly "thriving" at 3 months of age.[15]

### Effects on Lactation and Breastmilk

Adequate thyroid hormone serum levels are required for normal lactation. Replacing deficient thyroid levels should improve milk production caused by hypothyroidism. Supraphysiologic doses would not be expected to further improve lactation.

### References

1 Korevaar TIM, Leung AM, Alexander EK, et al. American Thyroid Association 2026 Guidelines for Thyroid Disease in Preconception, Pregnancy, and Postpartum. Thyroid 2026;36:481–544.42219800
2 Galofré JC, Haber RS, Mitchell AA, et al. Increased postpartum thyroxine replacement in Hashimoto's thyroiditis. Thyroid 2010;20:901–8.20615129
3 de Fátima Vélez-Pérez R, Arias-Borrego A, Velasco I, et al. Liquid chromatography (ion mobility) coupled to organic and inorganic mass spectrometry for determination of eight thyroid hormones in human milk with enantiomeric separation of thyroxine. Food Chem 2025;492:145542.40716411
4 Sato T, Suzuki Y. Presence of triiodothyronine, no detectable thyroxine and reverse triiodothyronine in human milk. Endocrinol Jpn 1979;26:507–13.499092
5 Varma SK, Collins M, Row A, et al. Thyroxine, tri-iodothyronine, and reverse tri-iodothyronine concentrations in human milk. J Pediatr 1978;93:803–6.712487
6 Mallol J, Obregon MJ, Morreale de Escobar GM. Analytical artifacts in radioimmunoassay of L-thyroxin in human milk. Clin Chem 1982;28:1277–82.7074933
7 Oberkotter LV, Tenore A. Separation and radioimmunoassay of T3 and T4 in human breast milk. Horm Res 1983;17:11–8.6551313
8 Koldovský O. Hormones in milk. Vitam Horm 1995;50:77–149.7709605
9 Zhang Q, Lian XL, Chai XF, et al. Relationship between maternal milk and serum thyroid hormones in patients with thyroid related diseases. Zhongguo Yi Xue Ke Xue Yuan Xue Bao 2013;35:427–31.23987491
10 Bode HH, Vanjonack WJ, Crawford JD. Mitigation of cretinism by breast-feeding. Pediatrics 1978;62:13–6.683777
11 Letarte J, Guyda H, Dussault JH, et al. Lack of protective effect of breast-feeding in congenital hypothyroidism: Report of 12 cases. Pediatrics 1980;65:703–5.7367075
12 van Wassenaer AG, Stulp MR, Valianpour F, et al. The quantity of thyroid hormone in human milk is too low to influence plasma thyroid hormone levels in the very preterm infant. Clin Endocrinol (Oxf) 2002;56:621–7.12030913
13 Abbassi V, Steinour A. Successful diagnosis of congenital hypothroidism in four breast-fed neonates. J Pediatr 1980;97:259–61.7400893
14 Ito S, Blajchman A, Stephenson M, et al. Prospective follow-up of adverse reactions in breast-fed infants exposed to maternal medication. Am J Obstet Gynecol 1993;168:1393–9.8498418
15 Caplan RH, Wickus GG. Reduced calcitriol requirements for treating hypoparathyroidism during lactation. A case report. J Reprod Med 1993;38:914–8.8277494

## Substance Identification

### Substance Name

Liotrix

### CAS Registry Number

8065-29-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Thyroid Hormones